# Coagulation Factor IX

CASRN: 9001-28-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of coagulation factor IX during breastfeeding. Because it is a large protein molecule, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract.[1] Until more data become available, coagulation factor IX should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003

## Substance Identification

### Substance Name

Coagulation Factor IX

### CAS Registry Number

9001-28-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Blood Coagulation Factors

Coagulants